# Albumin, Iodinated I 125 Serum

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of albumin, iodinated I 125 serum (I 125 HSA) as a diagnostic agent. The International Commission on Radiological Protection states that breastfeeding should be interrupted for more than 3 weeks following diagnostic use of I 125 HSA. This usually will result in permanent discontinuation of breastfeeding for the current infant.[1]

Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at a safe level, she may resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[2]

### Drug Levels

I 125 is a low-energy pure gamma emitter with a physical half-life of 59.4 days.[1] Iodide is actively secreted into breastmilk and actively taken up by the mother's and infant's thyroid glands.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Mattsson S, Johansson L, Leide Svegborn S, et al. Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. ICRP Publication 128. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP 2015;44:7-321. doi:10.1177/0146645314558019 26069086
2 Stabin M, Breitz H. Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med 2000;41:863-73.10809203

## Substance Identification

### Substance Name

Albumin, Iodinated I 125 Serum

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Iodine Radioisotopes

Serum Albumin, Radio-Iodinated

Diagnostic Agents